# Olipudase Alfa

CASRN: 927883-84-9

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the clinical use of olipudase alfa during breastfeeding. Because olipudase alfa is a large protein molecule with a molecular weight of 76,000 Da, the amount in milk is likely to be very low. It is also likely to be partially destroyed in the infant's gastrointestinal tract and absorption by the infant is probably minimal. Until more data become available, olipudase alfa should be used with caution during breastfeeding, especially while nursing a newborn or preterm infant.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

## Substance Identification

### Substance Name

### CAS Registry Number

927883-84-9

### Drug Class

Breast Feeding

Lactation

Milk, Human

Enzymes

Esterases

Sphingomyelin Phosphodiesterase